# Larotrectinib

CASRN: 1223403-58-4

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of larotrectinib during breastfeeding. The manufacturer recommends that breastfeeding be discontinued during larotrectinib therapy and for 1 week after the last dose.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Larotrectinib

### CAS Registry Number

1223403-58-4

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antineoplastic Agents

Enzyme Inhibitors

Protein Kinase Inhibitors

Signal Transduction Inhibitors